# Garadacimab

CASRN: 2162134-62-3

## Drug Levels and Effects

### Summary of Use during Lactation

Garadacimab is an activated Factor XII (FXIIa) inhibitor used to prevent attacks of hereditary angioedema. No information is available on the clinical use of garadacimab during breastfeeding. Because garadacimab is a large protein molecule with a molecular weight of about 146,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

C1-esterase inhibitor

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199–207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591–3.33956488
3 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350–66.36931808

## Substance Identification

### Substance Name

Garadacimab

### CAS Registry Number

2162134-62-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

FXIIa Inhibitors